# Lasmiditan

CASRN: 439239-90-4

## Drug Levels and Effects

### Summary of Use during Lactation

There is no published experience with lasmiditan during breastfeeding. If lasmiditan is required by the mother of an older infant, it is not a reason to discontinue breastfeeding, but until more data become available, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Eletriptan, Rizatriptan, Sumatriptan, Zolmitriptan

## Substance Identification

### Substance Name

Lasmiditan

### CAS Registry Number

439239-90-4

### Drug Class

Breast Feeding

Lactation

Serotonin Receptor Agonists

Serotonin 5-HT1 Receptor Agonists

Vasoconstrictor Agents